# Epoetin Beta

CASRN: 677324-53-7

## Drug Levels and Effects

### Summary of Use during Lactation

Methoxy polyethylene glycol-epoetin beta is a synthetic form of erythropoietin that slowly releases the active drug, epoetin beta (recombinant human erythropoietin). Erythropoietin is a normal component of human milk. The excretion of exogenous methoxy polyethylene glycol-epoetin beta in breastmilk has not been studied; although the similar drug epoetin alfa has been studied and is considered to be acceptable during breastfeeding. Since no information is available on its use during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information on exogenous administration of epoetin beta was not found as of the revision date. However, breastmilk normally contains erythropoietin. Erythropoietin concentrations in human milk are in the range of approximately 4 to 5 units/L in the first 1 to 2 months postpartum and increase to 20 to 40 units/L by the third month and to 100 to 150 units/L by 12 months.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Enhancement of gastrointestinal tract maturation has been proposed as a function of erythropoietin in breastmilk.[1,2]

### Effects on Lactation and Breastmilk

In small studies, epoetin alfa administration decreased serum prolactin in patients with amyotrophic lateral sclerosis,[3] but had no effect in normal subjects or in patients with renal failure undergoing chronic ambulatory peritoneal dialysis.[4,5] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### Alternate Drugs to Consider

Epoetin Alfa

### References

1 Miller M, Iliff P, Stoltzfus RJ, Humphrey J. Breastmilk erythropoietin and mother-to-child HIV transmission through breastmilk. Lancet 2002;360:1246-8.12401271
2 Semba RD, Juul SE. Erythropoietin in human milk: Physiology and role in infant health. J Hum Lact 2002;18:252-61.12192960
3 Tokgöz B, Utas C, Dogukan A, et al. Influence of long term erythropoietin therapy on the hypothalamic-pituitary-thyroid axis in patients undergoing CAPD. Ren Fail 2002;24:315-23.12166698
4 Bernini GP, Mariotti F, Brogi G, et al. Effects of erythropoietin administration on prolactin secretion in normal subjects. Nephron 1993;65:522-6.8302403
5 Markianos M, Kosmidis ML, Sfagos C. Reductions in plasma prolactin during acute erythropoietin administration. Neuro Endocrinol Lett 2006;27:355-8.16816832

## Substance Identification

### Substance Name

Epoetin Beta

### CAS Registry Number

677324-53-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Colony-Stimulating Factors

Hematinics

Hematopoietic Cell Growth Factors